# Lacosamide

CASRN: 175481-36-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that a maternal dose of 200 mg daily produce low levels in milk. Although one infant who was exposed during pregnancy and breastfeeding was seepy and fed poorly, several others have been breastfed with no adverse effects. Development of exposed infants has been normal. Until more data are available lacosamide should only be used with careful monitoring for drowsiness and adequate weight gain during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A pregnant woman was treated with levetiracetam 1000 mg and lacosamide 100 mg twice daily as well as enoxaparin and labetalol for the rest of her pregnancy and postpartum. The lacosamide level in milk on day 5 postpartum (exact time unspecified) was 0.4 mg/L. The authors estimated that a fully breastfed infant would receive about 1.8% of the maternal weight-adjusted dosage.[1]

A woman took oral lacosamide 200 mg daily (dosage schedule not stated) throughout pregnancy and postpartum. At 20 days postpartum, breastmilk levels were 3.57 mg/L before the dose, 5.46 mg/L at 2 hours after the dose and 4.24 mg/L at 6 hours after the dose.[2]

An abstract reported that a relative infant dose of 29.9% was found in nursing mother(s) taking lacosamide, who provided 8 milk samples over 24 hours. The authors estimated that a breastfed infant could receive as much as 254% of the pediatric dose, but other details were not supplied.[3]

A mother was taking lacosamide 200 mg twice daily as well as brivaracetam 100 mg twice daily and perampanel 8 mg daily. Her milk lacosamide levels were 21 micromoles/L (5.26 mg/L) on day 5 postpartum 12 hours after the previous dose and 25 micromoles/L (6.26 mg/L) on week 5 postpartum 13 hours after the previous dose.[4]

A postpartum woman was taking lacosamide 50 mg twice daily. Her dose was increased to 100 mg twice daily (3.6 mg/kg daily) and the following day, milk samples were collected 75 minutes before and 60, 115, 300, and 500 minutes after a dose. The trough value was 2.77 mg/L, and the post-dose values were 2.32 mg/L at 60 minutes, 4.69 mg/L at 115 minutes, 3.97 mg/L at 300 minutes and 3.19 mg/L at 500 minutes after administration. The authors estimated a relative infant dose of 14.6% of the maternal weight-adjusted dosage.[5]

Two breastfeeding women who were taking lacosamide had lacosamide levels measured in their milk. One woman who was taking a dose of 200 mg daily plus lamotrigine had milk levels of 6.6 and 3.2 mg/L at 3 and 4 days postpartum, respectively. The other woman taking lacosamide 400 mg daily plus levetiracetam had milk levels of 3.7 and 6.6 mg/L at 3 and 4 days postpartum, respectively.[6]

Infant Levels. A pregnant woman was treated with levetiracetam 1000 mg and lacosamide 100 mg twice daily as well as enoxaparin and labetalol for the rest of her pregnancy and postpartum. Her infant was delivered at 36 weeks gestation and about 50% breastfed for the first 15 days of life. The infant had a cord blood lacosamide concentration of 3.9 mg/L at birth and a lacosamide blood level of 0.3 mg/L on day 8 of age.[1]

A woman took lacosamide and levetiracetam throughout pregnancy and while exclusively breastfeeding her infant. From milk levels measured at 1 month postpartum, the infant’s daily dosage of lacosamide was estimated to be 0.63 mg/kg daily via breastmilk. Although the relative dose was 22% of the maternal weight-adjusted dosage, the absolute dosage is much lower than doses reportedly given for infantile seizures. Further details of the study were not available in the published abstract.[7]

A mother was taking lacosamide 200 mg twice daily as well as brivaracetam 100 mg twice daily and perampanel 8 mg daily. Her infant was exclusively breastfed and had serum lacosamide concentration of 9 micromoles/L (2.25 mcg/L) on day 1, 7 micromoles/L (1.75 mg/L) on day 5 and 8 micromoles/L (2 mg/L) in week 5 postpartum, which are just below the lower end of the therapeutic range. At week 11 postpartum, the infant was partially breastfed and lacosamide was undetectable (<3 micromoles/L; <750 mcg/L) in the infant’s serum.[4]

A mother was taking lacosamide 200 mg daily during pregnancy and postpartum and exclusively breastfeeding her infant. A blood sample taken from the infant on day 1 of life contained 2.4 mg/L of lacosamide, reflecting transplacental passage. On day 10 of life, the infant had a serum lacosamide level of <1 mg/L.[8]

Two breastfeeding women taking lacosamide had serum lacosamide measured in both the mother and her infant. One infant whose mother was taking 400 mg daily plus lamotrigine had a serum level of 1.4 mg/L at 3 days postpartum, and an infant-to-maternal serum concentration ratio of 0.35 at 3 days postpartum. The other infant whose mother was taking lacosamide 200 mg daily plus levetiracetam had a serum level of 1.4 mg/L at 3 days postpartum, and an infant-to-maternal serum concentration ratio of 0.16 at 3 days postpartum.[6]

### Effects in Breastfed Infants

A pregnant woman suffered blood clots in the sinuses and 2 small intracranial hemorrhages followed by status epilepticus at 8 weeks of gestation. She was treated with levetiracetam 1000 mg and lacosamide 100 mg twice daily as well as enoxaparin and labetalol for the rest of her pregnancy and postpartum. Her infant was delivered at 36 weeks gestation and about 50% breastfed for the first days of life. The infant was sleepy and fed poorly, but pauses in breastfeeding did not improve the infant's condition. Breastfeeding was discontinued at 15 days postpartum and the infant gradually improved. The infant showed normal development at 7 months of age.[1] Lacosamide and levetiracetam were probably the cause of the infant's sedation and poor feeding.

One center reported 3 mothers with epilepsy who took lacosamide while breastfeeding their infants. The extent of breastfeeding was not clearly stated, but one woman only partially breastfed her infant. The first mother took levetiracetam 2000 mg daily plus lacosamide 200 mg twice daily and breastfed her infant for 7 months with no infant adverse effects at 24 months of age. The second mother took lacosamide 300 mg daily and partially breastfed her infant for 8 months with normal developmental milestones at 6, 12 and 18 months of age. The third mother took lacosamide 400 mg daily and breastfed for 9 months without any feeding or alertness problems and no cognitive alterations or developmental delays at 36 months of age.[9]

A woman took lacosamide and levetiracetam throughout pregnancy and while exclusively breastfeeding her infant. Despite receiving a relatively high dose in breastmilk, the infant reportedly had achieved developmental milestones and had no health problems at 6 months postpartum.[7]

An infant was exclusively breastfed by a mother taking brivaracetam, lacosamide and perampanel for 6 weeks, then partially breastfed. The infant did not exhibit reduced wakefulness or feeding problems. At one year of age, the mother reported normal development.[4]

A mother was taking lacosamide 200 mg daily during pregnancy and postpartum. Her exclusively breastfed infant had no drug-related adverse events during the 9-month follow-up period.[8]

Three women taking lacosamide during pregnancy and lactation were reported by one center. One woman breastfed for 12 months while taking 200 mg twice daily. No medical problems or developmental delays were detected when the child was 12 months of age. The second woman breastfed for 6 months while taking 150 mg twice daily. Normal developmental milestones were reached at 12 months of age, and no health problems were detected. The third woman breastfed for 7 months while taking 200 mg twice daily. No medical issues or developmental delays were identified when the child reached the age of four years of age.[10]

Two mothers were taking lacosamide in dosages of 150 to 300 mg daily while breastfeeding (extent not stated). One breastfed for 6 months and the other for 14 months. No adverse reactions were seen in the infants.[11]

A single-center retrospective study of medical records of women with epilepsy found 21 women who took either 100 mg of lacosamide alone (n = 1) or 400 mg daily (n = 20) other antiepileptics during pregnancy. Twelve of these women breastfed (extent not stated) for at least 6 months postpartum with no infant neurodevelopmental delay after 12 months. The most common reported reason for not breastfeeding was insufficient milk production.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Ylikotila P, Ketola RA, Timonen S, et al. Early pregnancy cerebral venous thrombosis and status epilepticus treated with levetiracetam and lacosamide throughout pregnancy. Reprod Toxicol 2015;57:204–6.26187779
2 Zarubova J, Kremlackova V, Borecka K, et al. Plasma and breast milk levels of lacosamide before, during and post pregnancy. Epilepsia 2016;57:69. doi:10.1111/epi.13609
3 Monfort A, Jutras M, Martin B, et al. New data on the transfer of untested medication into breast milk. Birth Defects Res 2021;113:831. doi:10.1002/bdr2.1928
4 Landmark CJ, Rektorli L, Burns ML, et al. Pharmacokinetic data on brivaracetam, lacosamide and perampanel during pregnancy and lactation. Epileptic Disord 2021;23:426–31.33935028
5 Furugen A, Nishimura A, Umazume T, et al. Simple and validated method to quantify lacosamide in human breast milk and plasma using UPLC/MS/MS and its application to estimate drug transfer into breast milk. J Pharm Health Care Sci 2023;9:26.37653499
6 Kacirova I, Urinovska R, Grundmann M. Therapeutic monitoring of lacosamide, perampanel, and zonisamide during breastfeeding. Epilepsy Res 2024;199:107264.38041996
7 Kohn E, Dinavitser N, Gandelman-Marton R, et al. Lacosamide levels in blood and breastmilk during pregnancy and lactation: A case report. Reprod Toxicol 2020;97:9–10. doi:10.1016/j.reprotox.2020.04.043
8 Cercos M, Seqat I, Facile A, et al. Lacosamide use during breastfeeding: A case report and a literature review. Fundam Clin Pharmacol 2024;38:575–8.38054544
9 Lattanzi S, Cagnetti C, Foschi N, et al. Lacosamide during pregnancy and breastfeeding. Neurol Neurochir Pol 2017;51:266–9.28385340
10 Bosak M, Dziedzic R, Matwiej K, et al. Outcomes following exposure to lacosamide monotherapy during pregnancy and breastfeeding - a prospective case series. Neurol Neurochir Pol 2024;58:203–6.38305480
11 Wang Y, Zhang Y, Wang X, et al. Clinical study on lacosamide treatment of epilepsy during pregnancy. Chinese Journal of Neurology 2025;58:286–91. doi:10.3760/cma.j.cn113694-20240913-00621
12 Saramak K, Kaml M, Peball M, et al. Lacosamide safety during pregnancy and breastfeeding: A single-centre experience and comprehensive narrative review. Pharmacy (Basel) 2026;14:58.42042850

## Substance Identification

### Substance Name

Lacosamide

### CAS Registry Number

175481-36-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants